# Halothane

CASRN: 151-67-7

## Drug Levels and Effects

### Summary of Use during Lactation

Halothane is no longer available in the United States. There is no published experience with the therapeutic use of halothane as an anesthetic during breastfeeding, but trace amounts were found in the milk of a practicing anesthesiologist who had administered halothane in the operating room. Various recommendations have been made regarding breastfeeding after halothane anesthesia, from discarding the first pumping after recovery to discarding breastmilk for 24 to 48 hours after the surgical procedure.[1,2] Although withholding breastfeeding for 24 h is probably unnecessary, a short-acting anesthetic is preferred. In one study, breastfeeding before general anesthesia induction reduced requirements of sevoflurane and propofol compared to those of nursing mothers whose breastfeeding was withheld or nonnursing women.[3] It is possible that requirements for other anesthetic agents would be affected similarly.

### Drug Levels

Maternal Levels. Foremilk samples taken on two occasions from a practicing anesthesiologist after administering halothane anesthesia in the operating room contained from 630 mcg/L to 2.1 mg/L (0.63-2.1 ppm) of halothane.[1] These values were higher than air samples from the operating room, but may be underestimates because of sampling techniques.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Desflurane, Enflurane, Isoflurane, Sevoflurane

### References

1 Coté CJ, Kenepp NB, Reed SB, et al. (1976). Trace concentrations of halothane in human breast milk. Br J Anaesth.
2 Hale TW. (1999). Anesthetic medications in breastfeeding mothers. J Hum Lact.
3 Bhaskara B, Dayananda VP, Kannan S, et al. (2016). Effect of breastfeeding on haemodynamics and consumption of propofol and sevoflurane: A state entropy guided comparative study. Indian J Anaesth.

## Substance Identification

### Substance Name

Halothane

### CAS Registry Number

151-67-7

### Drug Class

Breast Feeding

Lactation

Anesthetics, Inhalation